# Remdesivir

CASRN: 1809249-37-3

## Drug Levels and Effects

### Summary of Use during Lactation

Information from 5 patients indicate that milk levels of remdesivir and its active metabolite are very low in milk. Additionally, remdesivir is poorly absorbed orally, and the metabolite is only partially absorbed orally, so infants are not likely to absorb clinically important amounts of the drug from milk. Newborn infants have received intravenous remdesivir therapy for Ebola and for COVID-19 with no serious adverse drug reactions and it is FDA approved for use in infants of at least 28 days and weighing 3 kg.[1-3] Infants exposed via breastmilk have also not had any reported adverse reactions. Given this information, mothers receiving remdesivir do not need to avoid nursing, but until more data are available, remdesivir should be used with careful infant monitoring during breastfeeding.[4] The most common adverse effects reported after intravenous infusion include elevated aminotransferase and bilirubin levels and other liver enzyme elevations, diarrhea, rash, renal impairment and hypotension.

### Drug Levels

Maternal Levels. Two days after delivery, a woman was diagnosed with a SARS-CoV-2 infection. She was given 200 mg of remdesivir on the first day of therapy, then 100 mg daily for 4 more days. Although not stated, all doses are presumed to have been given intravenously. On day 5 of therapy, milk was collected just before the dose and 1, 3, 6, and 24 hours after the last dose. Remdesevir and its metabolite GS-441524 were measured in milk. The concentration of remdesivir in milk was 1.29 mcg/L one hour before administration on day 5, but undetectable (<0.5 mcg/L) in the other samples. The concentration of the active metabolite GS-441524 in the milk samples were 13.5 mcg/L before the fifth dose, 285 mcg/L at 3 hours after the dose and 64.3 mcg/L at 24 hours after the dose. The authors estimated the relative infant doses of remdesevir and GS-441524 in breastmilk as 0.007% and 1.6%, respectively. The half-life of GS-441524 in milk was estimated to be 9.3 hours.[5]

Four women with COVID-19 who received remdesivir provided 17 milk samples for analysis of remdesivir and its active metabolite GS-441524. All of the milk samples had unquantifiable (<100 mcg/L) concentrations of remdesevir. Eleven of the samples contained unquantifiable (<100 mcg/L) concentrations of GS-441524. The highest concentration of the metabolite in the remaining 6 samples from one woman was 168 mcg/L. Using this “worst-case” value, the infant dose would be 25.2 mcg/kg daily, which would be a relative infant dose of <5%.[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

The manufacturer reports that 11 breastfed infants were exposed to remdesevir in breastmilk from pharmacovigilance reports. The reports do not indicate adverse effects on breastfed infants from exposure to remdesivir and its metabolite through breastmilk.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nirmatrelvir

### References

1 Dörnemann J, Burzio C, Ronsse A, et al. First newborn baby to receive experimental therapies survives Ebola virus disease. J Infect Dis 2017;215:171-4.28073857
2 Mulangu S, Dodd LE, Davey RT, Jr, et al. A randomized, controlled trial of Ebola virus disease therapeutics. N Engl J Med 2019;381:2293-303.31774950
3 Frauenfelder C, Brierley J, Whittaker E, et al. Infant with SARS-CoV-2 infection causing severe lung disease treated with remdesivir. Pediatrics 2020;146:e20201701.32554811
4 Aleissa MM, Silverman EA, Paredes Acosta LM, et al. New perspectives on antimicrobial agents: Remdesivir treatment for COVID-19. Antimicrob Agents Chemother 2021;65:e01814-20.33139290
5 Wada YS, Saito J, Hashii Y, et al. Remdesivir and human milk: A case study. J Hum Lact 2022;38:248-51.35189734
6 Bertrand K, Sepulveda Y, Spiegel BJ, et al. Concentrations of remdesivir and GS-441524 in human milk from lactating individuals diagnosed with COVID-19. Pediatr Res 2024;96:269-72.38347172

## Substance Identification

### Substance Name

Remdesivir

### CAS Registry Number

1809249-37-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antimetabolites

Antiviral Agents